# Fluphenazine

CASRN: 69-23-8

## Drug Levels and Effects

### Summary of Use during Lactation

There is no published experience with fluphenazine during breastfeeding. Very limited long-term follow-up data indicate no adverse developmental effects when other phenothiazines are used alone. Because of the lack of published experience with fluphenazine during breastfeeding, other antipsychotic agents may be preferred, especially while nursing a newborn or preterm infant. Monitor the infant for drowsiness and developmental milestones, especially if other antipsychotics are used concurrently.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Like other phenothiazines, fluphenazine elevates serum prolactin and has caused galactorrhea.[1] The elevation is related to serum levels and lasts 2 to 4 weeks with the depot injectable formulation.[2,3] The maternal prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### Alternate Drugs to Consider

Haloperidol, Olanzapine, Quetiapine, Risperidone

### References

1 Kelly DL, Conley RR. A randomized double-blind 12-week study of quetiapine, risperidone or fluphenazine on sexual functioning in people with schizophrenia. Psychoneuroendocrinology 2006;31:340-6.16198059
2 Hooper JH, Jr, Welch VC, Shackelford RT. Abnormal lactation associated with tranquilizing drug therapy. JAMA 1961;178:506-7.14448766
3 Meltzer HY, Fang VS, Goode DJ. Prolactin and neuroleptics: Clinical implications for efficacy and toxicity. The effect of neuroleptics and alpha-methyl-para-tyrosine on serum prolactin levels in laboratory animals and man. Psychopharmacol Bull 1978;14:5-7.625539

## Substance Identification

### Substance Name

Fluphenazine

### CAS Registry Number

69-23-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antipsychotic Agents

Phenothiazines